# Cephradine

CASRN: 38821-53-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates cephradine produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. cephradine is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Six women were given cephradine 500 mg orally every 6 hours for 9 doses. Milk levels after the last dose were essentially constant for the 6 hours following the dose with a range of 0.62 to 0.68 mg/L.[1,2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cefazolin, Cephalexin, Dicloxacillin, Floxacillin, Oxacillin, Methicillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Mischler TW, Corson SL, Bolognese RJ, et al. Presence of cephradine in body fluids of lactating and pregnant women. Clin Pharmacol Ther 1974;15:214. doi:10.1002/cpt1974152200
2 Mischler TW, Corson SL, Larranaga A, et al. Cephradine and epicillin in body fluids of lactating and pregnant women. J Reprod Med 1978;21:130-6.569206

## Substance Identification

### Substance Name

Cephradine

### CAS Registry Number

38821-53-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins